# Meningococcal Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to meningococcal vaccine. Immunization of the mother during the third trimester of pregnancy markedly increases the amount of meningococcal antibodies in breastmilk.[1] Breastfed infants should be vaccinated according to the routine recommended schedules.[2,3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[2,4]

Immunization of pregnant or lactating women with meningococcal vaccine increased the specific secretory IgA content of milk.[5,6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Maertens K, De Schutter S, Braeckman T, et al. Breastfeeding after maternal immunisation during pregnancy: Providing immunological protection to the newborn: A review. Vaccine 2014;32:1786–92.24530929
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
4 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
5 Lakshman R, Seymour L, Akhtar S, et al. Secretory antibody responses to quadrivalent meningococcal vaccine in lactating mothers. Clin Infect Dis 2000;31:321. doi:10.1093/cid/31.1.211
6 Shahid NS, Steinhoff MC, Roy E, et al. Placental and breast transfer of antibodies after maternal immunization with polysaccharide meningiococcal vaccine: A randomized, controlled evaluation. Vaccine 2002;20:2404–9.12009297

## Substance Identification

### Substance Name

Meningococcal Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines